# Moringa

CASRN: 93165-54-9

## Drug Levels and Effects

### Summary of Use during Lactation

Moringa (Moringa oleifera, Moringa pterygosperma) leaves contain vitamins, minerals, and essential amino acids as well as several glycosides. It has been used as a galactogogue in Asia,[1-3] particularly in the Philippines where it is called malunggay. The most recent and comprehensive meta-analysis (14 studies; 865 subjects) indicates that Moringa increases serum prolactin and milk volume and quality.[4] The long-term benefit to breastfed infants has not been well studied. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[5,6] Moringa oleifera leaves are widely used as a food and medicine in Asia and Africa and studies have found no serious short-term adverse effects in nursing mothers who ingested Moringa leaves or in their breastfed infants.[4,7,8] However, Moringa may stimulate blood clotting, so caution is advisable in anyone at high risk for blood clots.[9]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A double-blind study in Indonesia compared the growth of breastfed infants whose mothers were given either Moringa leaf powder or Moringa leaf extract, both in a dose of 3.2 grams daily. After 3 months, the infants’ growth in weight or length did not differ between the two groups.[10]

### Effects on Lactation and Breastmilk

Two meta-analyses by the same group analyzed the outcomes of 6 studies of Moringa oleifera as a galactogogue. Two studies with 73 patients reported maternal serum prolactin levels and found that patients in the Moringa groups had a statistically significant average increase of 1950 milliIU/L and also found that weight gain at week 4 was 11.9% greater in the infants in the Moringa group. Pooling of two studies with a total of 51 patients revealed a significant mean increase of milk volume on day 7 in the Moringa groups of 124 mL.[11,12] One of the studies compared the effect of domperidone and metoclopramide to Moringa. On days 7 and 14, milk volume in the treatment groups was greater than in the placebo group. The highest volume was in the domperidone group, followed by metoclopramide, and Moringa. No correlation was found between serum prolactin and milk volume.[13]

Another meta-analysis by a different group combined the results of 8 small studies to look for increases in milk supply or increases in serum prolactin. This analysis included several papers not included in previous meta-analyses, with some having methodologic problems. The authors concluded that postpartum Moringa supplementation increased the quantity and quality of milk and one study found an increase in serum prolactin.[14]

A longitudinal study of 64 breastfeeding mothers given Moringa leaves powder 500 mg (n = 23), Moringa leaves extract 500 mg (n = 21), or iron-folic acid 60 mg or iron (n = 20) twice daily was conducted in a poor region of Indonesia. Mothers’ milk was analyzed for docosahexaenoic acid (DHA) and arachidonic acid at 6 months postpartum. No difference was found among the groups.[15]

A small study compared the milk quality of 10 mothers nursing infants between 1 and 4 months of age who ate one cookie containing 3.5 grams of Moringa flour daily to 7 mothers who did not eat the cookies. No difference was found after one month in the nutritional content of the milk of the two groups.[16]

A small, randomized study in Indonesia compared the infants of women given Moringa flour capsules (n = 18) to those of mothers given an iron and folate supplement (n = 18). At the end of 3 months, infants of mothers given Moringa flour were less likely to have been sick in the prior 3 months at 3 and 6 months of age. So many critical facts were left out of the reporting of the study, such as supplement doses, blinding, concealment, adherence, drop-outs, extent of breastfeeding, and infant evaluation methods that it is impossible to evaluate this study’s validity.[17]

A study in Indonesia compared the infants of mothers given supplements of either Moringa leaf powder, Moringa leaf extract or iron and folate during pregnancy and while breastfeeding. The end-point was social-personal development between 18 and 23 months of infant age. No differences were found between the groups. The report of methodology was lacking in many details such as dosage, blinding, concealment, adherence, extent of breastfeeding and intention-to-treat analysis so the results cannot be validated.[18]

A nonblinded study gave 37 primigravida mothers who breastfed healthy infants less than 40 days of age a food consisting of 150 grams each of Sauropus androgynus, Moringa oleifera and Vigna cylindrica (L) Skeels (Herbarium Medanense, Indonesia) 3 times daily for 7 days. Their infants were scored based on 6 parameters: Frequency of urination, color of urine, frequency of bowel movements, color and characteristics of stool, and the infant’s weight. The total value of these parameters increased from an average score of 4 before the intervention to a score of 5 at the end.[19] Although the authors claimed that this indicated improved breastmilk production, this scale is not validated and could have been affected by numerous variables. This study does not indicate a galactogogue effect of the product. A double-blind-randomized study compared primiparous mothers who received biscuits containing 900 mg of Sauropus androgynus extract (n = 22) to mothers who received placebo biscuits (n = 23). Mothers ate 9 biscuits a day for 14 days. Participants exclusively breastfed their healthy full-term, single babies with birth weights of 2500 grams or greater. Serum prolactin levels were measured between 7 to 10 am at baseline and on day 15. At the end of the study, the serum prolactin levels of the control group had fallen by 17% whereas the serum prolactin in the treatment group had increased by 6%, which was statistically significant.[20]

A nonblinded, nonrandomized study compared 23 postpartum mothers who received Moringa-containing cookies, iron and vitamin A to 23 postpartum mothers who received iron and vitamin A only, both for 14 days, beginning on the first day postpartum. The infants of the treated mothers had a greater weight gain on day 14 than those in the control group. The study did not mention the extent of breastfeeding or any supplementation that took place.[21]

A randomized, double-blinded, placebo-controlled trial in a Baby Friendly hospital compared capsules containing 450 mg Moringa oleifera leaf powder (n = 44) or an identical placebo (n = 44) twice a day before a meal in mothers with full-term, uncomplicated deliveries. Mothers were encouraged to breastfeed their infants and milk volume was determined by infant weighing. At 3 days postpartum, there was a 47% higher volume of milk in the Moringa group, but the difference was not statistically significant. At 6 months postpartum, 52% of women in the Moringa group were exclusively breastfeeding, which met the World Health Organization’s goal of 50% by 2025. The placebo group had a 46% exclusive breastfeeding rate at 6 months, which was not statistically different from the Moringa group.[7]

A randomized study in Kenyan mothers compared maternal supplementation with Moringa 20 grams daily (n = 22) to placebo (n = 22) for 3 months. At the end of the study, supplemented mothers had greater levels of alpha-carotene in their milk than unsupplemented mothers, but no differences were found in other carotenoids such as beta-carotene, cryptoxanthin, lutein, lycopene, and zeaxanthin.[22]

A small, randomized nonblinded trial compared milk production among mothers who had poor infant growth. Half of the mothers (n = 20) received 200 mL of Moringa soup daily for 20 days and the control group merely had a daily visit. Mothers in the intervention group produced more milk at the end of the trial than the control group.[23]

Breastfeeding mother–infant pairs (n = 50) living in Kisumu County, Kenya, were cluster-randomized by location to consume Moringa powder (20 grams daily) in corn porridge (the Moringa group) or corn porridge alone (the control group) for 3 months. At 3 months, mothers in the Moringa group expressed more milk than controls (mean 947 mL vs 618 mL). Infant serum IGF-1 concentration was greater in the Moringa group than in the control group (mean 25.2 mcg/L vs 17.8 mcg/L). There was no effect of Moringa on total milk lipid and protein concentrations, fatty acids, or infant growth.[24]

A meta-analysis of 4 randomized, controlled studies in the mothers of preterm neonates examined the efficacy of Moringa in increasing milk supply. The authors concluded that Moringa oleifera leaf capsules produced a small increase in milk volume at day 1 compared to placebo, which was not statistically significant. However, on days 2 and 3, the capsules produced much larger increases in milk volume, which were highly statistically significant.[25]

### References

1 Mollik AH. Plants from Sundarbans to the diet of lactating mothers during puerperium of Barguna district of Bangladesh. Pediatr Nephrol 2010;25:1904. doi:10.1007/s00467-010-1577-z
2 Panjaitan RGP, Aprilianti M, Titin, et al. Genetic potential of medicinal plants and their role in improving colostrum production in Dayak Kanayatn tribe, Bengkayang Regency, Indonesia. Sabrao Journal of Breeding and Genetics 2025;57:115–25. doi:10.54910/sabrao2025.57.1.12
3 Hussain K, Alshaqhaa MA, Ain N, et al. Medicinal plants used during childbirth and maternal-neonatal healthcare in Punjab, Pakistan. Res J Pharmacogn 2026;13:43–58. doi:10.22127/rjp.2026.578423.3127
4 Golshan-Tafti M, Bahrami R, Jayervand F, et al. Efficacy and safety of Moringa oleifera supplementation for increasing breast milk production in lactating mothers: A systematic review and meta-analysis. Gaz Egypt Paediatr Assoc 2026;74:46. doi:10.1186/s43054-026-00539-y
5 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
6 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
7 Fungtammasan S, Phupong V. The effect of Moringa oleifera capsule in increasing breast milk volume in early postpartum patients: A double-blind, randomized controlled trial. Eur J Obstet Gynecol Reprod Biol X 2022;16:100171.36440058
8 Estrella MCP, Mantaring JB, David GZ, et al. A double-blind, randomized controlled trial on the use of malunggay (Moringa oleifera) for augmentation of the volume of breastmilk among non-nursing mothers of preterm infants. Philipp J Pediatr 2000;49:3–6.
9 Ebhohon E, Miller D. Moringa oleifera leaf extract induced pulmonary embolism-a case report. Int J Emerg Med 2022;15:16.35413819
10 Zakaria, Sirajuddin, Veni H, et al. Linear growth of infants aged 0-6 months in breastfeeding mothers who consume Moringa oleifera leaf extract capsules: Randomized controlled double-blind design. Food Res 2022;6:135–43. doi:10.26656/fr.2017.6(5).720
11 King JS, Raguindin PFN, Dans LF. Moringa oleifera (Malunggay) as a galactagogue for breastfeeding mothers: A systematic review and meta-analysis of randomized controlled trials. Philipp J Pediatr 2013;61:34–42.
12 Raguindin PFN, Dans LF, King JF. Moringa oleifera as a galactagogue. Breastfeed Med 2014;9:323–4.24892837
13 Co MM, Hernandez EA, Co BG. A comparative study on the efficacy of the different galactogogues among mothers with lactational insufficiency. Philipp J Pediatr 2002;51:88–93.
14 Ammar M, Russo GL, Altamimi A, et al. Moringa oleifera supplementation as a natural galactagogue: A systematic review on its role in supporting milk volume and prolactin levels. Foods 2025;14 41517080
15 Sarih K, Siradjuddin S, Maddepungeng M, et al. Moringa oleifera intake during pregnancy and breastfeeding toward docosahexaenoic acid and arachidonic acid levels in breast milk. Open Access Macedonian J Med Sci 2020;8:757–61. doi:10.3889/oamjms.2020.4614
16 Sumarni, Puspasari I, Mallongi A, et al. Effect of Moringa oleifera cookies to improve quality of breastmilk. Enferm Clin 2020;30 (Suppl 4):99–103. doi:10.1016/j.enfcli.2019.10.050
17 Suhartatik, Hadju V, Muis M, et al. The effect of Moringa oleifera flour given for mothers breastfeeding against morbidity of baby ages 0-6 months in Jeneponto District. Indian J Public Health Res Dev 2020;11:1760–5. doi:10.37506/v11/i1/2020/ijphrd/194106
18 Hastuti H, Veni Hadju V, Citrakesumasari C, et al. The effect of Moringa oleifera on pregnant women and breastfeeding mothers toward social-personal development of children aged 18–23 months in Jeneponto, South Sulawesi. Open Access Maced J Med Sci 2020:747–51. doi:10.3889/oamjms.2020.4607
19 Wuryandari AG, Ariasih IN, Julaecha. The influence of consuming Sauropus androgynus L. Merr, Moringa oleifera Lam, and Vigna cylindrica (L) Skeels on breastfeeding mothers: Randomized controlled trial. NSC Nursing 2022 doi:10.32549/OPI-NSC-73
20 Indrayani D, Shahib MN, Husin F. The effect of katuk (Sauropus androgunus (L) Merr) leaf biscuit on increasing prolactine (sic) levels of breastfeeding mother. Jurnal Kesehatan Masyarakat 2020;16:1–7. doi:10.15294/kemas.v16i1.11324
21 Pujiastuti RSE, Salsabila DIB, Anwar MC. Potential of Moringa leaf cookies to increast breastmilk production in postpartum mothers. Open Access Maced J Med Sci 2022;10:207–10. doi:10.3889/oamjms.2022.9494
22 Attia SL, Odhiambo SA, Mogaka JN, et al. Impact of maternal Moringa oleifera leaf supplementation on milk and serum vitamin A and carotenoid concentrations in a cohort of breastfeeding Kenyan women and their infants. Nutrients 2024;16:3425.39408390
23 Yasin Z, Nawawi A, Wibowo A, et al. Effects of Moringa oleifera on increasing breast milk in breastfeeding mothers with stunting toddlers in rural Batang-Batang District, Indonesia. Afr J Reprod Health 2024;28:34–4.39635867
24 Attia SL, Owuor PM, Odhiambo SA, et al. Effect of maternal Moringa oleifera leaf supplementation on maternal and infant nutritional status and human milk output: A pilot single-blinded cluster-randomized trial. Curr Dev Nutr 2025;9:107568.41282517
25 Cragg A, Levene I, Darabi S, et al. Herbal galactagogues to improve breastmilk production and lactation in mothers of preterm babies: A systematic review of clinical trials. Eur J Clin Nutr 2026;80:146–58.41350450

## Substance Identification

### Substance Name

Moringa

### CAS Registry Number

93165-54-9

### Scientific Name

Moringa oleifera

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Galactogogues

Phytotherapy

Plants, Medicinal